# Papaya

## Drug Levels and Effects

### Summary of Use during Lactation

Papaya (Carica papaya) fruit contains the proteolytic enzymes papain and chymopapain before ripening, but they are not present in the ripe fruit. Cooked, unripe papaya fruit has been used orally in India, Melanesia and Angola, and papaya leaves have been used in Indonesia as galactogogues, possibly by increasing prolactin.[1-6] No scientifically valid clinical trials support the use of papaya fruit or leaves as a galactogogue. Galactogogues should never replace evaluation and counseling on modifiable factors that affect milk production.[7,8] No data exist on the excretion of any components of papaya into breastmilk or on the safety and efficacy of papaya in nursing mothers or infants. Papaya fruit is "generally recognized as safe" (GRAS) as a food by the U.S. Food and Drug Administration. Papaya also contains carotenoids and can improve beta-carotene and vitamin A status in nursing mothers.[9] Allergic reactions to papaya, such as asthma and skin rashes are not uncommon and cross-reactions with other substances such as latex and kiwi have occurred. Those with allergies to papaya or cross reacting substances should avoid papaya.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

A small study compared papaya leaf extract in various doses to placebo in nursing mothers. It found that a dose of 800 mg daily was more effective than a dose of 600 mg daily or a placebo in raising serum prolactin levels after 8 days of treatment.[10]

A randomized, but not placebo-controlled trial gave postpartum mothers (n = 30) a mixture containing Sauropus androgynus extract, papaya leaves, mung beans, tamarind and sugar. One bottle of 400 mL of the mixture was taken daily for 4 weeks postpartum. A control group (n = 30) received breastfeeding counseling only. The amount of breastmilk produced was estimated weekly for 4 weeks by weighing mothers before and after feeding, although it is unclear how this was done and by whom. Daily milk production in the third week (801 vs 656 mL) and fourth week postpartum (909 vs 757 mL) was greater in the women who consumed the galactogogue mixture.[11]

A nonblinded study in Indonesia randomized postpartum women with perceived low milk supply to either an herbal decoction containing 25 grams Sauropus androgynus (katuk) leaves, 10 grams Coleus amboinicus (torbangun) leaves and 5 grams papaya leaves (n = 60) or to 500 mg Sauropus androgynus extract (CV Al-Ghuroba, Indonesia; n = 60). Patients were to take the product and weigh their infant twice daily for 28 days. Maternal serum prolactin was measured on day 14 and 28. Breast milk volume and infant’s weight increased on days 14 and 28, and serum prolactin levels decreased in both groups; however, the changes were not statistically significant. Mean infant weights increased, with no difference between the two treatments. Two mothers in the combination group and 3 in the extract group had increases in aspartate aminotransferase and/or alanine aminotransferase.[12]

### References

1 Sayed NZ, Deo R, Mukundan U. Herbal remedies used by Warlis of Dahanu to induce lactation in nursing mothers. Indian J Tradit Knowl 2007;6:602-5. https://nopr.niscpr.res.in/handle/123456789/1009
2 Bourdy G, Walter A. Maternity and medicinal plants in Vanuatu. I. The cycle of reproduction. J Ethnopharmacol 1992;37:179-96.1453707
3 Rasiya Beegam A, Nayar TS. Plants used for natal healthcare in folk medicine of Kerala, India. Indian J Tradit Knowl 2011;10:523-7.
4 Jendras G, Monizi M, Neinhuis C, et al. Plants, food and treatments used by BaKongo tribes in Uíge (northern Angola) to affect the quality and quantity of human breast milk. Int Breastfeed J 2020;15:88.33097071
5 Sayuti NA, Atikah N. The pattern of herbal medicines use for breastfeeding mother in Jogonalan, Klaten, Indonesia: A mini survey. BMC Complement Med Ther 2023;23:399.37936188
6 Herawati Y, Kalsum U, Arsana IW, et al. Molecular docking analysis of Carica papaya leaf's bioactive components as prolactin production modulator. J Appl Biol Biotechnol 2024;12:117-27. doi:10.7324/jabb.2024.155147
7 Brodribb W. ABM Clinical Protocol #9: Use of galactogogues in initiating or augmenting maternal milk production, second revision 2018. Breastfeed Med 2018;13:307-14.29902083
8 Breastfeeding challenges: ACOG Committee Opinion, Number 820. Obstet Gynecol 2021;137:e42-e53.33481531
9 Ncube TN, Greiner T, Malaba LC, et al. Supplementing lactating women with pureed papaya and grated carrots improved vitamin A status in a placebo-controlled trial. J Nutr 2001;131:1497-502.11340106
10 Pratiwi TE, Suwondo A. Exclusive breastfeeding improvement program using Carica papaya leaf extract on the levels of prolactin hormones. International Journal of Science and Research (IJSR) 2018;7:548-51.
11 Ngadiarti I, Agestika L, Srimiati M, et al. Sauropus androgynus, papaya leaves, and mung beans as mixed galactagogue drink for urban postpartum mothers. Jurnal Gizi Dan Pangan 2021;16:101-8. doi:10.25182/jgp.2021.16.2.101-108
12 Zulkarnain Z, Fitriani U, Ardiyanto D, et al. Galactagogue activity of poly-herbal decoction from Indonesia: A randomized open label controlled trial. J Complement Integr Med 2024;21:532-9.38644615

## Substance Identification

### Substance Name

Papaya

### Scientific Name

Carica papaya

### Drug Class

Breast Feeding

Lactation

Milk, Human

Complementary Therapies

Food

Phytotherapy

Plants, Medicinal